# Pancuronium

CASRN: 16974-53-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pancuronium during breastfeeding. Because it is highly polar and poorly absorbed orally, it is not likely to reach the breastmilk in high concentration or to reach the bloodstream of the infant.[1,2] When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Atracurium, Cisatracurium, Rocuronium

### References

1 Spigset O. (1994). Anaesthetic agents and excretion in breast milk. Acta Anaesthesiol Scand.
2 Dalal PG, Bosak J, Berlin C. (2014). Safety of the breast-feeding infant after maternal anesthesia. Paediatr Anaesth.

## Substance Identification

### Substance Name

Pancuronium

### CAS Registry Number

15500-66-0; 16974-53-1

### Drug Class

Breast Feeding

Lactation

Muscle Relaxants

Neuromuscular Nondepolarizing Agents